# Felbamate

CASRN: 25451-15-4

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of felbamate during breastfeeding, and because it can cause potentially fatal hematologic and hepatic toxicities, authors of authoritative reviews recommend that breastfeeding not be undertaken during maternal felbamate therapy until more safety data are available.[1,2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Bar-Oz B, Nulman I, Koren G, et al. (2000). Anticonvulsants and breastfeeding. A critical review. Paediatr Drugs.
2 Hägg S, Spigset O. (2000). Anticonvulsant use during lactation. Drug Saf.

## Substance Identification

### Substance Name

Felbamate

### CAS Registry Number

25451-15-4

### Drug Class

Breast Feeding

Lactation

Anticonvulsants